# Lanreotide

CASRN: 108736-35-2

## Drug Levels and Effects

### Summary of Use during Lactation

The excretion of lanreotide into breastmilk has not been studied. However, because it has a high molecular weight of 1096 daltons it is likely to be poorly excreted into breastmilk and it is a peptide that is likely digested in the infant’s gastrointestinal tract, so it is unlikely to reach the clinically important levels in infant serum. Lanreotide has been given by injection to newborn infants with congenital hyperinsulinemia; reversible mild elevation of liver enzymes occurred in some infants.[1] The manufacturer states that women should not breastfeed during treatment with depot lanreotide and for 6 months following the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two women with acromegaly received lanreotide 30 mg every 28 days and successfully breastfed, one for 1.5 months and the second for 3 months.[2]

A woman with acromegaly was treated with lanreotide Autogel 120 mg monthly, cabergoline 2 mg weekly and pegvisomant 80 mg weekly. She breastfed (extent not stated) her infant and they were followed for 12 years. Her child had normal growth and development.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Octreotide

### References

1 van der Steen I, van Albada ME, Mohnike K, . A multicenter experience with long-acting somatostatin analogues in patients with congenital hyperinsulinism. Horm Res Paediatr 2018;89:82-9.29241206
2 Cheng S, Grasso L, Martinez-Orozco JA, . Pregnancy in acromegaly: Experience from two referral centers and systematic review of the literature. Clin Endocrinol (Oxf) 2012;76:264-71.21777265
3 Popescu AD, Carsote M, Valea A, . Approach of acromegaly during pregnancy. Diagnostics (Basel) 2022;12:2669.36359512

## Substance Identification

### Substance Name

Lanreotide

### CAS Registry Number

108736-35-2

### Drug Class

Breastfeeding

Lactation

Milk, Human

Hormones

Antineoplastic Agents